# Tiludronate

CASRN: 89987-06-4

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of tiludronate during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. However, absorption of tiludronate by a breastfed infant is unlikely.

### Drug Levels

Tiludronate is highly bound to calcium and is poorly absorbed orally (average in adults 6% on an empty stomach, 0.6% with food), so absorption of tiludronate by a breastfed infant is unlikely.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Pamidronate

## Substance Identification

### Substance Name

Tiludronate

### CAS Registry Number

89987-06-4

### Drug Class

- Breast Feeding
- Lactation
- Bisphosphonates
- Bone Density Conservation Agents
- Diphosphonates